# Magnetic Resonance Imaging

## Drug Levels and Effects

### Summary of Use during Lactation

Magnetic resonance imaging (MRI) uses magnetic fields and radio waves to obtain images. These are present only during the short time that the image is being taken and leave no radiation, radioactivity or magnetism in the body or in the milk. MRI scans have no known effect on the milk in the breast at the time of imaging. No special precautions are required.

For information on contrast media used with MRI imaging, see the LactMed entry for the specific contrast agent.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Magnetic Resonance Imaging

### Drug Class

- Breast Feeding
- Lactation
- Diagnostic Imaging